# Poliovirus Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and other expert opinion state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to poliovirus vaccine. The injectable polio vaccine now recommended in the United States is inactivated and poses no risk when given to mothers who are breastfeeding.[1,2] Breastfeeding also appears to reduce infant side effects associated with routine childhood immunization and can reduce the efficacy of oral polio vaccines.[3] However, some studies indicate that breastfeeding might improve infant response to oral polio vaccine.[4,5] Breastfed infants should be vaccinated according to the routine recommended schedules. Exclusive breastfeeding improves the response to oral polio vaccine in countries with poor infant nutrition and high rates of infant diarrhea.

### Drug Levels

Maternal Levels. Nursing women in Sweden and in Pakistan were studies between 1 and 10 months postpartum. Swedish women had received 3 to 5 doses of killed poliovirus vaccine during their childhood, while none of low-income Pakistani women had been vaccinated. Eight Swedish women and ten Pakistani women were given subcutaneous injections of trivalent killed poliovirus vaccine (Swedish National Bacteriological Laboratory). The Swedish women had only low increases in milk IgA antibody titers in milk that returned to baseline by 28 days after vaccination. Five of 11 Pakistani women had milk IgA increases that were about an order of magnitude greater than the Swedish women that persisted at 28 days after vaccination; two had a slight decrease in titers. Twenty other Pakistani women received oral trivalent live poliovirus vaccine (Institut Mérieux, Lyon, France, or Connaught Labs, Toronto, Canada). Half of these women also received subcutaneous injections of cholera vaccine (Swedish National Bacteriological Laboratory).

The oral vaccination with live poliovirus vaccine resulted in a statistically significant decrease in titers of secretory IgA antibodies in the milk of all women who had detectable titers before vaccination. The decrease in titers was much less than when the live poliovirus vaccine was given together with the cholera vaccine.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Breastfed infants are less likely to have fever and may be less likely to experience anorexia and reduced energy intake after routine childhood immunization than those who are not breastfed.[7,8]

Administration of oral poliovirus vaccine to nursing infants is less effective if it is given the neonatal period, due to maternal antibodies in colostrum and breastmilk.[9-11] However, when given according to accepted vaccination schedules, breastfeeding does not interfere with the infant's response to oral polio vaccine.[12-14]

One study found that in previously vaccinated infants at 21 to 40 months of age breastfed infants had higher neutralizing antibody titers, higher secretory IgA levels in saliva and higher fecal IgM against polio than formula-fed infants.[15]

A study in Zambia found that infants whose mothers were infected with HIV had reduced antibody responses to oral polio vaccination than infants whose mothers were HIV negative. However, when results were corrected for duration of breastfeeding, the difference was small. The authors concluded that HIV-positive mothers breastfed for shorter durations (mean 6 months) than HIV-negative mothers (mean 15 months), resulting in a lowered immune response to oral polio vaccine.[16]

A study in Bangladesh found that antibody titers for oral poliovirus vaccine (OPV) type 3 were inadequate in 13.6% of infants who received OPV at 6 months and 7.3% of infants who received OPV at 12 months. Failure rates for types 1 and 2 were lower, as was the failure rate for intramuscular polio vaccine. Malnutrition and more than 2 diarrheal episodes appeared to be the causative factors for the poor response. Exclusive breastfeeding was associated with a better response to OPV 3.[4]

A subsidiary analysis of a study in Chilean infants that compared trivalent inactivated polio vaccine plus bivalent oral polio vaccine to trivalent inactivated polio vaccine alone found that breastfed infants might have a better mucosal response against type 2 poliovirus.[5]

A study in Zimbabwe found that supplementing infants who received oral polio vaccine and their mothers with a single large dose of vitamin A did not improve their antibody response to the vaccine.[17]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
3 Parker EP, Ramani S, Lopman BA, et al. Causes of impaired oral vaccine efficacy in developing countries. Future Microbiol 2018;13:97–118.29218997
4 Haque R, Snider C, Liu Y, et al. Oral polio vaccine response in breast fed infants with malnutrition and diarrhea. Vaccine 2014;32:478–82.24300591
5 Brickley EB, Wieland-Alter W, Connor RI, et al. Intestinal immunity to poliovirus following sequential trivalent inactivated polio vaccine/bivalent oral polio vaccine and trivalent inactivated polio vaccine-only immunization schedules: Analysis of an open-label, randomized, controlled trial in Chilean infants. Clin Infect Dis 2018;67 (Suppl 1):S42–S50.30376086
6 Svennerholm AM, Hanson LA, Holmgren J, et al. Antibody responses to live and killed poliovirus vaccines in the milk of Pakistani and Swedish women. J Infect Dis 1981;143:707–11.6894606
7 Pisacane A, Continisio P, Palma O, et al. Breastfeeding and risk for fever after immunization. Pediatrics 2010;125:e1448–52.20478932
8 López-Alarcón M, Garza C, Habicht JP, et al. Breastfeeding attenuates reductions in energy intake induced by a mild immunologic stimulus represented by DPTH immunization: possible roles of interleukin-1beta, tumor necrosis factor-alpha and leptin. J Nutr 2002;132:1293–8.12042449
9 Vaccine World Health Organization Collaborative Study Group on Oral Poliovirus. Factors affecting the immunogenicity of oral poliovirus vaccine: a prospective evaluation in Brazil and the Gambia. J Infect Dis 1995;171:1097–106.7751683
10 Plotkin SA, Katz M, Brown RE, et al. Oral poliovirus vaccination in newborn African infants. Am J Dis Child 1966;111:27–30.5900282
11 Zaman S, Carlsson B, Jalil F, et al. Specific antibodies to poliovirus type I in breastmilk of unvaccinated mothers before and seven years after start of community-wide vaccination of their infants with live, oral poliovirus vaccine. Acta Paediatr Scand 1991;80:1174–82.1785290
12 John TJ, Devarajan LV, Luther L, et al. Effect of breast-feeding on seroresponse of infants to oral poliovirus vaccination. Pediatrics 1976;57:47–53.174056
13 Triki H, Abdallah MV, Ben Aissa, R, et al. Influence of host related factors on the antibody response to trivalent oral polio vaccine in Tunisian infants. Vaccine 1997;15:1123–9.9269056
14 Kim-Farley R, Brink E, Orenstein W, et al. Vaccination and breast-feeding. JAMA 1982;248:2451–2.7131700
15 Hahn-Zoric M, Fulconis F, Minoli I, et al. Antibody responses to parenteral and oral vaccines are impaired by conventional and low protein formulas as compared to breast-feeding. Acta Paediatr Scand 1990;79:1137–42.2085099
16 Sanz-Ramos M, Manno D, Kapambwe M, et al. Reduced poliovirus vaccine neutralising-antibody titres in infants with maternal HIV-exposure. Vaccine 2013;31:2042–9.23474309
17 Church JA, Rukobo S, Govha M, et al. Neonatal vitamin A supplementation and immune responses to oral polio vaccine in Zimbabwean infants. Trans R Soc Trop Med Hyg 2019;113:110–5.30576507

## Substance Identification

### Substance Name

Poliovirus Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines